# Vitamin A

CASRN: 68-26-8; 79-81-2

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin A (retinol) and provitamin A carotenoids are normal components of human milk.[1] Vitamin A in milk has antioxidant properties.[2] The recommend dietary intake in lactating women is 1300 mcg retinol daily, compared to 770 mcg daily during pregnancy. The recommended daily intake for infants aged 6 months or less is 400 mcg. Vitamin A deficiency is not uncommon, and maternal supplementation may be needed during lactation to achieve the recommended daily vitamin A intake. Maternal single doses up to 120,000 mcg (400,000 IU) or daily doses up to 1500 mcg (5,000 IU) are not expected to harm the breastfed infant. Higher maternal doses have not been studied. Daily maternal doses above 3,000 mcg (10,000 IU) should be avoided.[3]

### Drug Levels

Vitamin A (retinol) measurements are expressed in the literature as mcg, IU, or micromoles. One mcg is equal to 3.33 IU (0.3 mcg = 1 IU), and also to 0.0035 micromoles (286 mcg = 1 micromole). Beta-carotene from vitamin supplements is one-half as potent as retinol. One mcg of beta-carotene from vitamin supplements is therefore equal to 0.5 mcg retinol (see the LactMed beta-carotene record). A serum retinol concentration less than 0.7 micromoles/L (<200 mcg/L) indicates biochemical vitamin A deficiency, and 0.7 to 1.05 micromoles/L (200 to 300 mcg/L) indicates marginal deficiency.[2] Milk levels less than 1.05 micromoles/L (<300 mcg/L) indicates low milk vitamin A content.[4]

Most retinol present in milk are retinyl esters (e.g., retinyl acetate), which can be de-esterified in the infant's digestive tract.[5] Mature milk retinol levels correlate with maternal serum retinol levels, and levels of milk retinol and beta-carotene are correlated with one another.[6-11] Milk retinol and carotenoid levels in colostrum are higher than in mature milk. Intra-individual colostrum levels vary widely, but are consistently higher than and not correlated with maternal serum levels, suggesting active colostrum enrichment.[12] Levels decrease over the first 1 to 2 weeks postpartum and then stabilize.[2,13,14] Vitamin A partitions into milk fat and milk retinol levels are positively correlated with milk fat.[9,15] Hindmilk levels are higher than foremilk.[16,17] Milk vitamin A content increases as maternal dietary vitamin A increases.[18] Nutritionally deficient mothers have lower milk retinol and provitamin A carotenoid levels than those of well-nourished mothers.[6,19,20] Premature birth may also be associated with lower milk retinol levels.[21,22]

Maternal Levels. Healthy mothers not taking a supplement have retinol levels averaging 800 to 1400 mcg/L in colostrum and 300 to 800 mcg/L in mature milk.[10,12,14,17,20,23,24] Beta-carotene, lutein and lycopene are among the most abundant carotenoids in milk, totaling 300 to 400 mcg/L in the first week postpartum and 50 to 200 mcg/L in mature milk.[1,10,13,14,20]

Numerous studies targeting lactating women living in regions with endemic vitamin A deficiency have evaluated the effects of a single vitamin A dose of 200,000 to 400,000 IU given in the early postpartum period. Most of these studies demonstrate small increases in milk retinol levels compared to the control or placebo group during the first 3 months postpartum. In a meta-analysis of six such studies, the average increase in milk retinol was 57 mcg/L in the mothers treated with vitamin A compared to placebo.[25] Studies that controlled for milk fat content had similar outcomes. In two of the analyzed studies, the frequencies of low milk levels (<300 mcg/L) were 25% and 50% lower in supplemented mothers compared to control. Based on the average increase in milk retinol reported in this meta-analysis, the single, high-dose vitamin A postpartum maternal supplementation strategy would provide breastfed infants with an extra 3.5 to 13 mcg/kg of retinol daily after the first postpartum week.

A study involving 102 mothers from Hyderabad, India given 200,000 IU of vitamin A within 24 hours of birth reported higher average milk retinol levels in the vitamin A group at postpartum day 10 (1100 mcg/L vs. 800 mcg/L), and day 30 (750 mcg/L vs 600 mcg/L), but not on or after day 45. The increase in milk retinol intake from maternal supplementation during the first month after birth for a breastfed infant based on these results would be about 30 mcg/kg daily.[23] In a similar study conducted in northeastern Brazil, average milk retinol was higher in the colostrum of the supplemented group 24 hours after the dose (2360 mcg/L vs 1010 mcg/L), but was not significantly different at 30 days (525 mcg/L vs. 478 mcg/L).[26]

A large study conducted in Ghana, Peru, and India gave vitamin A 200,000 IU or placebo to 2,990 breastfeeding mothers at 18 to 42 days postpartum. The average milk retinol level at baseline was similar in both groups (52.2 vs 51.6 nmol/gram of fat), but was higher at 2 months postpartum in the vitamin A group (49.8 vs. 42.7 nmol/gram of fat). The percentage of mothers at 2 months with milk retinol of 28 nanomoles/gram of fat or less, indicating low milk vitamin A content, was 49% in the treatment group compared to 79% in the placebo group. At 6 months postpartum, there were no differences between the groups.[27]

Studies comparing a 400,000 IU dose to a 200,000 IU dose of vitamin A have found no differences in milk vitamin A levels between the two dosage groups.[28-32]

One hundred forty healthy, low-income mothers in Rabat, Morocco were given 200,000 IU of vitamin A as a one-time dose beginning at 2 to 3 weeks after birth. In addition, the mothers were randomized to receive vegetable oil fortified with retinyl palmitate 30 IU per gram of oil, or non-fortified oil. The oil was to be used in the home during routine food preparation, not as a daily required study dose. Both groups had milk retinol levels near 515 mcg/L at baseline. After three months, average milk levels were 386 mcg/L in the nonfortified group and 592 mcg/L in the fortified group; 20% of mothers in the nonfortified group had low milk levels (<300 mcg/L) compared to none in the fortified group. After 6 months, the differences were 172 mcg/L vs. 398 mcg/L, and 100% vs. 2.7%, respectively.[33] Based on the average milk levels reported, exclusively breastfed infants would receive approximately an extra 30 mcg/kg retinol daily from the regimen used in this study.

Daily supplementation of 2165 IU vitamin A was compared to no supplementation in 119 Gambian pregnant and postpartum women. Milk retinol levels collected once weekly between postpartum weeks 3 and 15 were higher in the supplemented mothers, ranging from 800 to 1000 mcg/L, compared to 500 to 700 mcg/L in the non-supplemented mothers. Adjusting for milk fat content did not change the results.[34] Based on the milk levels reported, breastfed infants would receive an extra 45 mcg/kg retinol daily as a result of this long-term, pregnancy through postpartum extended supplementation approach.

Two hundred forty-five healthy, exclusively breastfeeding mothers in Nanjing, China were randomized to receive a daily vitamin A supplement of 1800 IU or placebo for 2 months beginning at 1 to 2 months postpartum. Both groups had similar average milk retinol levels of approximately 450 mcg/L at baseline. After two months, average milk level in the supplemented group was 290 mcg/L compared to 240 mcg/L in the control group. The difference amounts to an extra 7.5 mcg/kg retinol daily received by the breastfed infant from the short period of maternal supplementation.[24]

HIV-infected pregnant women with vitamin A deficiency or marginal deficiency in Tanzania were enrolled in a study to receive 1 of 4 supplements during pregnancy and lactation. Groups received either multivitamins (thiamine, riboflavin, vitamin B6, niacin, vitamin B_12_, vitamin C, vitamin E, and folic acid), multivitamins plus vitamin A 5000 IU and beta-carotene 30 mg, the same doses of vitamin A and beta-carotene alone, or placebo once daily beginning in their second trimester and continuing for two years. Breastmilk samples were collected at delivery and at 3-month intervals thereafter up to 1 year. Breastmilk retinol levels in the vitamin A and beta-carotene supplemented groups were consistently about 2 to 3 micromoles/L (570 to 860 mcg/L) higher during the entire study period than in the groups that received no supplement. The average milk levels were 1400 mcg/L vs 640 mcg/L at 3 months, 1350 mcg/L vs 640 mcg/L at 6 months, and 1300 mcg/L vs 630 mcg/L at 12 months.[35] Based on the maximum average retinol levels reported, an exclusively breastfed infant would receive an extra 114 mcg/kg daily of retinol from the maternal supplementation used in this study.

Premature birth may be associated with lower milk retinol levels. A southeastern Brazilian study of non-supplemented mothers reported average levels of 286 mcg/L at around 30 days postpartum in those who delivered preterm babies compared to 534 mcg/L in those delivering at term.[21] Similarly, in a study from Mexico of non-supplemented mothers who experienced high-risk pregnancies (e.g., preeclampsia, anemia, advanced maternal age or gestational diabetes), premature birth increased the odds of low milk retinol levels compared to term birth, and compared to mothers with normal pregnancies.[22]

Infant Levels. One hundred nine Indian mothers were given a single dose of vitamin A 200,000 IU or no vitamin A within 48 hours of delivery. At 3 months postpartum the average infant serum retinol level was higher (1.06 micromoles/L vs 0.77 micromoles/L) and the percentage of infants with serum levels <0.7 micromoles/L was lower (2.6% vs 44.8%) in the vitamin A group. One-half of all infants had umbilical cord retinol levels <0.7 micromoles/L, but differences between the two groups for this baseline measurement were not reported.[36]

One hundred forty Indonesian mothers were given a single oral dose of 300,000 IU vitamin A as retinyl palmitate or placebo between 7 and 21 days postpartum. Baseline infant serum retinol was not measured. At 6 months postpartum, average infant serum retinol levels did not differ between the two groups. However, the proportion of infants with levels <0.52 micromoles/L was lower in the treatment group, 15% vs 36%. Breastfeeding rates and infant diet were the same in both groups.[37]

One hundred forty mothers in Bangladesh were given 200,000 IU vitamin A or placebo between 1 and 3 weeks postpartum. Baseline infant serum retinol was not measured. Infant vitamin A dietary and supplemental intakes during the first 6 months of age were not different between the two groups. Infants were partially breastfed for 6 months, at which time the average infant serum retinol level was higher in the vitamin A group, 0.84 micromoles/L compared to 0.77 micromoles/L in the placebo group. Biochemical indicators of adequate infant vitamin A storage were also better in the vitamin A group.[38]

One hundred ten Gambian women were given 200,000 IU vitamin A shortly after delivery. Breastfeeding rates were not given, but >90% of participants were able to provide milk for study analysis during the 6 months postpartum milk collection period. Average infant serum retinol increased from 0.67 micromoles/L in cord blood to 0.85 micromoles/L at 9 months. The percentage of infants with levels <0.7 micromoles/L decreased from 61% at birth to 31% at 9 months.[28]

To compare a 200,000 IU to a 400,000 IU maternal dose, 173 Brazilian mothers were given 200,000 IU vitamin A once after delivery, or once after delivery and again at 10 days postpartum. Their infants were more than 75% breastfed for 6 months, but not supplemented with vitamin A directly. The average infant serum levels in umbilical cord blood and in blood at 2, 4 and 6 months postpartum were similar in both groups: 1.1, 1.2, 1.5, and 1.55 micromoles/L, respectively. The increase compared to baseline was statistically significant in both groups. This study suggests that a single high maternal dose of vitamin A can improve infant vitamin A status through breastmilk, but a 400,000 IU dose offered no added improvement in status over a 200,000 IU maternal postpartum dose.[39]

One hundred exclusively breastfeeding Indian mothers were given 200,000 IU vitamin A or placebo as a single oral dose within 24 hours after delivery. Average infant serum retinol levels increased from approximately 0.5 micromoles/L in cord blood to 0.8 to 0.9 micromoles/L at 6 weeks to 6 months in both groups.[23]

In Kenya, 564 mothers were given 400,000 IU vitamin A or placebo within 24 hours of birth. About 30% of the mothers were vitamin A deficient at study entry. Their infants were also randomized to receive 100,000 IU vitamin A or placebo at 14 weeks of age. The average serum retinol level was similar in all infants at 14 weeks of age, about 0.9 micromoles/L, and again at 26 weeks among all infants who received placebo, about 1.0 micromoles/L. The lack of a difference did not change when controlling for maternal baseline serum retinol. Breastfeeding rates were not reported.[40]

In Brazil, 61 breastfeeding mothers received 200,000 IU vitamin A or placebo between 20 and 30 days postpartum. At 3 months postpartum the average infant serum retinol levels were similar: 0.69 micromoles/L in the vitamin A group and 0.64 micromoles/L in the placebo group. Seventy-five percent of infants were exclusively breastfed throughout the study period.[8]

### Effects in Breastfed Infants

Maternal vitamin A supplementation during pregnancy and lactation has not reduced mortality or the risk of anemia in breastfed infants living in developing regions, but there may be health benefits related to improved antioxidant capacity and immune function.[25,41,42]

One hundred exclusively breastfeeding mothers in India were given 200,000 IU vitamin A or placebo as a single oral dose within 24 hours after delivery. There were no differences in weight gain of their infants during postpartum hospitalization between the groups, and no infants in the vitamin A group had symptoms of hypervitaminosis A, such as excessive crying, raised fontanelle and vomiting. All the infants received a dose of oral polio vaccine (OPV) between 48 and 72 hours after birth. There were no differences between the two groups in OPV seroconversion rates or antibody titers at 6 weeks.[43] Similarly, 1,085 exclusively breastfeeding mothers in Ghana were given 200,000 IU vitamin A or placebo at 3 to 4 weeks postpartum. There were no differences in infant immune response to polio or tetanus vaccination at 6 weeks and 6 months of age.[44]

The infants of 197 mothers in Gambia given either 200,000 or 400,000 IU vitamin A in the first week after delivery showed no signs of adverse reactions to vitamin A during the 12-month follow-up period.[28]

Two hundred forty-five healthy, exclusively breastfeeding mothers in Nanjing, China were randomized to receive a daily vitamin A 1800 IU supplement or placebo for 2 months beginning at 1 to 2 months postpartum. By the end of the 2 month study, infants in both groups had similar rates of febrile illnesses, respiratory tract infections, diarrhea, and eczema, although it was not stated how these data were collected.[24]

### Effects on Lactation and Breastmilk

HIV-infected mothers in Tanzania had a higher rate of severe subclinical mastitis (36%), determined by measuring serial milk electrolyte concentrations, when taking a daily vitamin A supplement during pregnancy and postpartum compared to placebo (23%). Mothers taking a multivitamin without vitamin A also had a higher rate (38%) than placebo, suggesting a vitamin A-independent effect. Given the many other benefits of multivitamin supplementation in this specific patient population, the authors did not recommend avoiding supplementation due to a potential risk of mastitis.[45]

In a Brazilian study, 57 mothers received either 200,000 IU vitamin A or no vitamin A within 2 days after birth. At 24 hours after administration, the average level of alpha-tocopherol (vitamin E) was 16.4% lower in the colostrum of mothers who received in the vitamin A (28 micromoles/L compared to 24.5 micromoles/L), but it was not significantly different at 30 days after administration, at about 6 micromoles/L.[26] The reported vitamin E colostrum levels in this study are within normal limits, thus the small reduction in the vitamin A-supplemented mothers may not be clinically important. A different Brazilian research group conducting the same experiment using a vitamin A supplement with low-dose vitamin E 110 IU added as a preservative found no effect of vitamin A on colostrum alpha-tocopherol.[46]

### Alternate Drugs to Consider

Beta-Carotene

### References

1 Khachik F, Spangler CJ, Smith JC, Jr, et al. Identification, quantification, and relative concentrations of carotenoids and their metabolites in human milk and serum. Anal Chem 1997;69:1873-81.9164160
2 Szlagatys-Sidorkiewicz A, Zagierski M, Jankowska A, et al. Longitudinal study of vitamins A, E and lipid oxidative damage in human milk throughout lactation. Early Hum Dev 2012;88:421-4.22085741
3 National Institutes of Health Office of Dietary Supplements. Vitamin A fact sheet for health professionals. 2022. https://ods.od.nih.gov/factsheets/VitaminA-HealthProfessional/
4 Brown E, Akre J. Indicators for assessing vitamin A deficiency and their application in monitoring and evaluating intervention programmes. Geneva: World Health Organization 1996;WHO/NUT/96.10. http://www.who.int/nutrition/publications/micronutrients/vitamin_a_deficiency/WHO_NUT_96.10/en/
5 Lammi-Keefe CJ, Jensen RG. Fat-soluble vitamins in human milk. Nutr Rev 1984;42:365-71.6396543
6 Butte NF, Calloway DH. Evaluation of lactational performance of Navajo women. Am J Clin Nutr 1981;34:2210-5.7293949
7 Mello-Neto J, Rondo PH, Oshiiwa M, et al. The influence of maternal factors on the concentration of vitamin A in mature breast milk. Clin Nutr 2009;28:178-81.19249141
8 Martins TM, Ferraz IS, Daneluzzi JC, et al. Impact of maternal vitamin A supplementation on the mother-infant pair in Brazil. Eur J Clin Nutr 2010;64:1302-7.20842169
9 Dror DK, Allen LH. Retinol-to-fat ratio and retinol concentration in human milk show similar time trends and associations with maternal factors at the population level: A systematic review and meta-analysis. Adv Nutr 2018;9 (Suppl 1):332S-46S.29846525
10 Gebre-Medhin M, Vahlquist A, Hofvander Y, et al. Breast milk composition in Ethiopian and Swedish mothers. I. Vitamin A and beta-carotene. Am J Clin Nutr 1976;29:441-51.944526
11 Green MH, Lopez-Teros V, Avila-Prado J, et al. Use of theoretical women and model-based compartmental analysis to evaluate the impact of vitamin A intake with or without a daily vitamin A supplement on vitamin A total body stores and balance during lactation. J Nutr 2024;154:2374-80.38857673
12 de Vries JY, Pundir S, Mckenzie E, et al. Maternal circulating vitamin status and colostrum vitamin composition in healthy lactating women-a systematic approach. Nutrients 2018;10:E687.29843443
13 Gossage CP, Deyhim M, Yamini S, et al. Carotenoid composition of human milk during the first month postpartum and the response to beta-carotene supplementation. Am J Clin Nutr 2002;76:193-7.12081834
14 Sakurai T, Furukawa M, Asoh M, et al. Fat-soluble and water-soluble vitamin contents of breast milk from Japanese women. J Nutr Sci Vitaminol (Tokyo) 2005;51:239-47.16261995
15 Stoltzfus RJ, Underwood BA. Breast-milk vitamin A as an indicator of the vitamin A status of women and infants. Bull World Health Organ 1995;73:703-11.8846497
16 Hampel D, Shahab-Ferdows S, Islam MM, et al. Vitamin concentrations in human milk vary with time within feed, circadian rhythm, and single-dose supplementation. J Nutr 2017;147:603-11.28202638
17 Nimmannun K, Davis CR, Srisakda P, et al. Breast milk retinol concentrations reflect total liver vitamin a reserves and dietary exposure in thai lactating women from urban and rural areas. J Nutr 2023;152:2689-98.36170963
18 Kodentsova VM, Vrzhesinskaya OA. Evaluation of the vitamin status in nursing women by vitamin content in breast milk. Bull Exp Biol Med 2006;141:323-7.17073150
19 Bates CJ, Prentice A. Breast milk as a source of vitamins, essential minerals and trace elements. Pharmacol Ther 1994;62:193-220.7991643
20 Lu Z, Chan YT, Lo KK, et al. Carotenoids and vitamin A in breastmilk of Hong Kong lactating mothers and their relationships with maternal diet. Nutrients 2022;14:2031.35631170
21 Souza G, Dolinsky M, Matos A, et al. Vitamin A concentration in human milk and its relationship with liver reserve formation and compliance with the recommended daily intake of vitamin A in pre-term and term infants in exclusive breastfeeding. Arch Gynecol Obstet 2015;291:319-25.25118833
22 Sámano R, Martínez-Rojano H, Hernández RM, et al. Retinol and alpha-tocopherol in the breast milk of women after a high-risk pregnancy. Nutrients 2017;9:E14.28045436
23 Bhaskaram P, Balakrishna N, Nair M, Sivakumar, B. Vitamin A deficiency in infants: Effects of postnatal maternal vitamin A supplementation on the growth and vitamin A status. Nutr Res 2000;20:769–78. doi:10.1016/S0271-5317(00)00176-7
24 Ding Y, Hu P, Yang Y, et al. Impact of maternal daily oral low-dose vitamin a supplementation on the mother–infant pair: A randomised placebo-controlled trial in China. Nutrients 2021;13:2370.34371880
25 Oliveira JM, Allert R, East CE. Vitamin A supplementation for postpartum women. Cochrane Database Syst Rev 2016;3:CD005944.27012320
26 Grilo EC, Medeiros WF, Silva AG, et al. Maternal supplementation with a megadose of vitamin A reduces colostrum level of alpha-tocopherol: A randomised controlled trial. J Hum Nutr Diet 2016;29:652-61.27231056
27 Bahl R, Bhandari N, Wahed MA, et al. Vitamin A supplementation of women postpartum and of their infants at immunization alters breast milk retinol and infant vitamin A status. J Nutr 2002;132:3243-8.12421835
28 Darboe MK, Thurnham DI, Morgan G, et al. Effectiveness of an early supplementation scheme of high-dose vitamin A versus standard WHO protocol in Gambian mothers and infants: a randomised controlled trial. Lancet 2007;369:2088-96.17586304
29 Idindili B, Masanja H, Urassa H, et al. Randomized controlled safety and efficacy trial of 2 vitamin A supplementation schedules in Tanzanian infants. Am J Clin Nutr 2007;85:1312-9.17490968
30 Bezerra DS, de Araujo KF, Azevedo GM, et al. A randomized trial evaluating the effect of 2 regimens of maternal vitamin A supplementation on breast milk retinol levels. J Hum Lact 2010;26:148-56.20110563
31 Tomiya MTO, de Arruda IKG, da Silva Diniz A, et al. The effect of vitamin A supplementation with 400 000 IU vs 200 000 IU on retinol concentrations in the breast milk: A randomized clinical trial. Clin Nutr 2017;36:100-6.26725194
32 Bezerra DS, de Melo ATA, de Oliveira Kcan, et al. Breast milk retinol levels after vitamin A supplementation at different postpartum amounts and intervals. Nutrients 2022;14:3570.36079825
33 Atalhi N, El Hamdouchi A, Barkat A, et al. Combined consumption of a single high-dose vitamin A supplement with provision of vitamin A fortified oil to households maintains adequate milk retinol concentrations for 6 months in lactating Moroccan women. Appl Physiol Nutr Metab 2020;45:275-82.31365834
34 Villard L, Bates CJ. Effect of vitamin A supplementation on plasma and breast milk vitamin A levels in poorly nourished Gambian women. Hum Nutr Clin Nutr 1987;41:47-58.3570862
35 Webb AL, Aboud S, Furtado J, et al. Effect of vitamin supplementation on breast milk concentrations of retinol, carotenoids and tocopherols in HIV-infected Tanzanian women. Eur J Clin Nutr 2009;63:332-9.17940544
36 Vinutha B, Mehta MN, Shanbag P. Vitamin A status of pregnant women and effect of post partum vitamin A supplementation. Indian Pediatr 2000;37:1188-93.11086300
37 Stoltzfus RJ, Hakimi M, Miller KW, et al. High dose vitamin A supplementation of breast-feeding Indonesian mothers: Effects on the vitamin A status of mother and infant. J Nutr 1993;123:666-75.8463867
38 Rice AL, Stoltzfus RJ, de Francisco A, et al. Maternal vitamin A or beta-carotene supplementation in lactating Bangladeshi women benefits mothers and infants but does not prevent subclinical deficiency. J Nutr 1999;129:356-65.10024613
39 Dos Santos CS, Kruze I, Fernándes T, et al. The effect of a maternal double megadose of vitamin A supplement on serum levels of retinol in children aged under six months. J Nutr Metab 2013;2013:876308.24455219
40 Ayah RA, Mwaniki DL, Magnussen P, et al. The effects of maternal and infant vitamin A supplementation on vitamin A status: A randomised trial in Kenya. Br J Nutr 2007;98:422-30.17391562
41 Miller MF, Stoltzfus RJ, Iliff PJ, et al. Effect of maternal and neonatal vitamin A supplementation and other postnatal factors on anemia in Zimbabwean infants: a prospective, randomized study. Am J Clin Nutr 2006;84:212-22.16825698
42 Cox SE, Arthur P, Kirkwood BR, et al. Vitamin A supplementation increases ratios of proinflammatory to anti-inflammatory cytokine responses in pregnancy and lactation. Clin Exp Immunol 2006;144:392-400.16734607
43 Bhaskaram P, Balakrishna N. Effect of administration of 200,000 IU of vitamin A to women within 24 hrs after delivery on response to PPV administered to the newborn. Indian Pediatr 1998;35:217-22.9707874
44 Newton S, Cousens S, Owusu-Agyei S, et al. Vitamin A supplementation does not affect infants' immune responses to polio and tetanus vaccines. J Nutr 2005;135:2669-73.16251628
45 Arsenault JE, Aboud S, Manji KP, et al. Vitamin supplementation increases risk of subclinical mastitis in HIV-infected women. J Nutr 2010;140:1788-92.20739447
46 García L, Ribeiro K, Araujo K, et al. Alpha-tocopherol concentration in the colostrum of nursing women supplemented with retinyl palmitate and alpha-tocopherol. J Hum Nutr Diet 2010;23:529-34.20831709

## Substance Identification

### Substance Name

Vitamin A

### CAS Registry Number

68-26-8; 79-81-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins